# Oteseconazole

CASRN: 1340593-59-0

## Drug Levels and Effects

### Summary of Use during Lactation

Oteseconazole must not be used by women of reproductive potential because of the possibility of fetal or infant harm. It is extremely long-lasting and could remain in the milk for as long as 2 years after a course of therapy. An alternate drug should be used.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Clotrimazole, Fluconazole, Miconazole, Nystatin

## Substance Identification

### Substance Name

Oteseconazole

### CAS Registry Number

1340593-59-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents

Dermatologic Agents